# Ketamine

CASRN: 6740-88-1

## Drug Levels and Effects

### Summary of Use during Lactation

Ketamine and its active metabolite appear in milk in very low levels, and its oral bioavailability is low, indicating a low risk to breastfed infants. Available data indicate that ketamine use in nursing mothers may not affect the breastfed infant or lactation.[1] The manufacturer recommends that the use of ketamine in nursing mothers should be limited to anesthesia.

### Drug Levels

Ketamine is metabolized to norketamine, dehydronorketamine and hydroxynorketamine. Of the metabolites, only norketamine is active, but it has only about one-third the activity of ketamine.

Maternal Levels. Four women with well-established lactation were given two doses of ketamine intramuscularly, 0.5 and 1 mg/kg with 5 to 14 days between doses. Complete milk expressions were collected at 3, 6, 9 and 12 hours after a dose. The average peak levels of ketamine in milk were 51 mcg/L after the 0.5 mg/kg dose and 125 mcg/L after the 1 mg/kg dose, both at 3 hours after the dose. Very little drug was detected in milk of one mother after 12 hours. The authors calculated relative infant doses of 0.65% after the 0.5 mg/kg dose and 0.77% after the 1 mg/kg dose. The metabolites norketamine, dehydronorketamine and hydroxynorketamine had similar patterns of excretion into milk, with norketamine having levels similar to those of ketamine.[2]

A participant in a clinical study who was about 6 months postpartum was given a sub-anesthetic ketamine infusion at 0.1 mg/kg per hour for 12 hours. She collected 7 milk samples over 20 hours after the start of the infusion. The peak ketamine level of about 115 mcg/L occurred at about 8 hours after the start of the infusion. Norketamine and dehydronorketamine concentrations were fairly constant over the study duration with a peak norketamine concentration of about 45 mcg/L occurring at about 12 hours and peak dehydronorketamine of 15 mcg/L occurring at about 2 hours after the start of the infusion.[3]

Four women who were receiving ketamine infusions at varying intervals collected milk samples over a 24-hour period beginning just before the infusion was begun. The maximum concentrations of both ketamine and norketamine were observed at 1 hour after the start of the infusion and their concentrations declined over 24 hours. Their dosages ranged from 0.61 to 4.17 mg/kg. The estimated daily infant dosage of ketamine ranged from 0.003 mg/kg to 0.017 mg/kg, and the estimated daily infant dosage of norketamine ranged from 0.005 mg/kg to 0.018 mg/kg. The relative infant dosage of ketamine ranged from 0.34% to 0.57%, and relative infant dosage of norketamine was 0.29% to 0.95%.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four mothers who received epidural analgesia with lidocaine and bupivacaine for cesarean section also received general anesthesia with ketamine and midazolam (dosages not specified). Their infants were either breastfed or received their mother’s breastmilk by bottle. No adverse effects were reported in the infants.[5]

A retrospective chart review of 298 mothers and infants born at 37 weeks or beyond was conducted to determine the effects of ketamine and diazepam on breastfed infants after maternal tubal ligation surgery. Surgery occurred on a median of day 2 (range 1 to 6) postpartum. Most infants were fully breastfed, with breastfeeding resumed 2 to 4 hours after the procedure. No differences were found in weight loss or phototherapy requirements of infants whose mothers received low dose (<1.16 mg/kg) and high dose (1.16 mg/kg or more) ketamine.[6]

### Effects on Lactation and Breastmilk

A pregnant woman sustained 28% body surface area burns near term. She underwent an emergency cesarean section on her due date under ketamine anesthesia. Although the infant required vigorous resuscitation, the infant began breastfeeding immediately. The infant had transient jaundice that resolved in a few days.[7]

A study compared women undergoing cesarean section who received either placebo or S-ketamine (esketamine) 0.5 mg/kg intramuscularly, followed by a continuous infusion of 2 mcg/kg/minute for 12 hours. This low dose was used to enhance analgesia and reduce residual pain rather than to provide anesthesia. All women received intraspinal bupivacaine 8 to10 mg and sufentanil 5 mcg for analgesia, as well as midazolam 0.02 mg/kg intravenously before the S-ketamine or placebo injection. Postoperatively, patients received patient-controlled intravenous morphine for 24 hours, followed by acetaminophen, oral ketorolac and a single dose of ondansetron 8 mg intravenously as needed. Of the 56 patients enrolled in the study (28 in each group), 13 in each group were contacted at 3 years postpartum. Patients who received placebo reported breastfeeding for an average of 10.5 months and those who received S-ketamine reported breastfeeding for an average of 8 months; however, the difference was not statistically significant.[8]

A randomized, double-blind study compared the effects of intravenous propofol 0.25 mg/kg, ketamine 0.25 mg/kg, ketamine 25 mg plus propofol 25 mg, and saline placebo for pain control in mothers after a cesarean section. A single dose was given immediately after clamping of the umbilical cord. The time to the first breastfeeding was 58 minutes in those who received placebo, 31.9 minutes with ketamine and 25.8 minutes with propofol plus ketamine. The time was significantly shorter than the other groups with the combination.[9]

A small preliminary study of the use of ketamine for the prevention of postpartum depression after cesarean section gave mothers ketamine 0.5 mg/kg by either subcutaneous or intravenous injection or a placebo. No statistical difference in the breastfeeding rates were seen; however, the numbers of patients in each group was small (7 or 8), so the study was underpowered to make a final determination.[10]

### Alternate Drugs to Consider

Dexmedetomidine, Etomidate, Methohexital, Propofol, Thiopental

### References

1 Mitchell J, Jones W, Morris S, . Guidelines for anaesthesia and sedation for patients who are breastfeeding: Guidelines from the Association of Anaesthetists. Anaesthesia 2026;81:685-701.41532178
2 Wolfson P, Cole R, Lynch K, . The pharmacokinetics of ketamine in the breast milk of lactating women: Quantification of ketamine and metabolites. J Psychoactive Drugs 2023;55:354-8.35880962
3 Shahane A, Zhao W, Pakalapati N, . Simultaneous quantitation of ketamine, norketamine and dehydronorketamine in human milk using a novel ultra high-performance liquid chromatography-mass spectrometry (UPLC-MS/MS) assay. J Pharm Biomed Anal 2023;234:115502.37311376
4 Majdinasab E, Datta P, Krutsch K, . Pharmacokinetics of ketamine transfer into human milk. J Clin Psychopharmacol 2023;43:407-10.37683228
5 Ortega D, Viviand X, Lorec AM, . Excretion of lidocaine and bupivacaine in breast milk following epidural anesthesia for cesarean delivery. Acta Anaesthesiol Scand 1999;43:394-7.10225071
6 Gilder ME, Tun NW, Carter A, . Outcomes for 298 breastfed neonates whose mothers received ketamine and diazepam for postpartum tubal ligation in a resource-limited setting. BMC Pregnancy Childbirth 2021;21:121.33563234
7 Mokube JA, Verla VS, Mbome VN, . Burns in pregnancy: A case report from Buea Regional Hospital, Cameroon. Pan Afr Med J 2009;3:21.21532730
8 Suppa E, Valente A, Catarci S, . A study of low-dose S-ketamine infusion as “preventive” pain treatment for cesarean section with spinal anesthesia: Benefits and side effects. Minerva Anestesiol 2012;78:774-81.22374377
9 Jaafarpour M, Vasigh A, Khajavikhan J, . Effect of ketofol on pain and complication after Caesarean delivery under spinal anaesthesia: A randomized double-blind clinical trial. J Clin Diagn Res 2017;11:UC04-UC7.
10 Monks DT, Palanisamy A, Jaffer D, . A randomized feasibility pilot-study of intravenous and subcutaneous administration of ketamine to prevent postpartum depression after planned cesarean delivery under neuraxial anesthesia. BMC Pregnancy Childbirth 2022;22:786.36271352

## Substance Identification

### Substance Name

Ketamine

### CAS Registry Number

6740-88-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Intravenous

Hypnotics and Sedatives

Anesthetics, Dissociative

Excitatory Amino Acid Antagonists